# Adapalene

CASRN: 106685-40-9

## Drug Levels and Effects

### Summary of Use during Lactation

Topical adapalene has not been studied during breastfeeding. Because it is poorly absorbed after topical application, and blood levels are less than 0.25 mcg/L with long-term use, it is probably a low risk to the nursing infant.[1] Absorption should be minimized by applying it to the smallest possible surface area of the body for the shortest time possible. Do not apply to the nipple area and ensure that the infant’s skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Benzoyl Peroxide, Tretinoin

### References

1 Akhavan A, Bershad S. Topical acne drugs: Review of clinical properties, systemic exposure, and safety. Am J Clin Dermatol 2003;4:473–92.12814337

## Substance Identification

### Substance Name

Adapalene

### CAS Registry Number

106685-40-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents